# Alpelisib

CASRN: 1217486-61-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on alpelisib during breastfeeding. Because the drug is 89% protein bound, amounts in milk are likely to be low. Because of possible infant toxicity, the manufacturer recommends that breastfeeding be discontinued during alpelisib therapy and for 1 week after the final dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Alpelisib

### CAS Registry Number

1217486-61-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents